# Lorazepam

CASRN: 846-49-1

## Drug Levels and Effects

### Summary of Use during Lactation

Lorazepam has low levels in breastmilk, a short half-life relative to many other benzodiazepines, and is safely administered directly to infants. Evidence from nursing mothers indicates that lorazepam does not cause any adverse effects in breastfed infants with usual maternal dosages. Monitor the infant for sedation, poor feeding and poor weight gain.

### Drug Levels

Maternal Levels. Four women were given 3.5 mg of lorazepam orally 2 hours before undergoing cesarean section. Colostrum levels of lorazepam averaged 8.5 mcg/L at 4 hours after the dose; conjugated lorazepam metabolites were not measured.[1]

Another woman taking lorazepam 2.5 mg orally twice a day for the first 5 days postpartum had milk levels of free and conjugated lorazepam of 12 and 35 mcg/L, respectively, at an unspecified time on day 5.[2] Since infants can deconjugate and absorb glucuronides, the total drug level is probably more important than the free drug alone. Using the total amount excreted, an exclusively breastfed infant would receive about 7 mcg/kg daily with this maternal dosage or about 8.5% of the maternal weight-adjusted dosage.

A woman who was 4 weeks postpartum was taking lorazepam 2.5 mg 1 to 3 times daily and lormetazepam, which is partially metabolized to lorazepam, 2 mg once daily. On day 5 of therapy after taking 2 doses of lorazepam in the previous 8 hours, her lorazepam milk level was 123 mcg/L. On day 6 after having taken 3 doses in the previous 24 hours, her milk lorazepam level was 89 mcg/L. On day 7, milk levels were 55 and 40 mcg/L at 14 and 18.5 hours after her last dose, respectively.[3]

Three women who were taking oral lorazepam 0.5 mg daily donated milk samples between 3 and 6 days postpartum at 2 hours after a dose at the estimated peak serum concentration and just before a dose. One woman who was taking a dose of 1 mg daily had a 2-hour milk level of 1.64 mcg/L and a trough milk level of 0.826 mcg/L. The other 2 women 2-hour milk levels of 1.72 and 1.98 mcg/L. Both had trough milk levels less than the lower limit of quantification of 0.5 mcg/L.[4]

A woman who was nursing her 6.5-month-old infant took a single dose of 1 mg of lorazepam. Six milk samples were taken between 1.5 and 23.1 hours after the dose. All were below the lower limit of quantification of 5 mcg/L. Semi-quantitative levels indicated that the highest milk value of 2.1 mcg/L occurred at 1.5 hours after the dose and decreased to 0.65 mcg/L at 23.1 hours. The authors estimated an RID ranging from 1.35% to 1.80% using standard milk intake values.[5]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

The newborn infant of a mother taking 2.5 mg of lorazepam orally twice daily for 5 days after delivery showed no signs of sedation.[2]

In a telephone follow-up study, 124 mothers who took a benzodiazepine while nursing reported whether their infants had any signs of sedation. Sixty-four mothers took lorazepam while breastfeeding and none reported sedation in her infant.[6]

A prospective cohort study of infants breastfed by mothers in an inpatient mother-baby psychiatric unit in India followed 7 infants who were exposed to risperidone in breastmilk; most received partial supplementation. One infant whose mother was taking risperidone 4 mg and lorazepam 2 mg developed sedation that resolved when lorazepam was discontinued.[7]

A mother took 1 mg of lorazepam as needed. No adverse effects occurred in her 6.5-month-old breastfed infant over the next 24 hours.[5]

### Effects on Lactation and Breastmilk

A study retrieved pharmacovigilance data on lorazepam from the FDA’s FAERS database and the EU’s Eudravigilance database. FAERS identified 25 reports of lorazepam exposure via human milk and Eudravigilance just one. Central nervous system (CNS) related symptoms were reported, but in all these cases, lorazepam was part of CNS polypharmacy. No lorazepam monotherapy related events were found.[5]

### Alternate Drugs to Consider

Oxazepam, Temazepam

### References

1 Summerfield RJ, Nielsen MS. Excretion of lorazepam into breast milk. Br J Anaesth 1985;57:1042–3.4041315
2 Whitelaw AG, Cummings AJ, McFadyen IR. Effect of maternal lorazepam on the neonate. Br Med J (Clin Res Ed) 1981;282:1106–8.6113019
3 Lemmer P, Schneider S, Muhe A, et al. Quantification of lorazepam and lormetazepam in human breast milk using GC-MS in the negative chemical ionization mode. J Anal Toxicol 2007;31:224–6.17555647
4 Nishimura A, Furugen A, Umazume T, et al. Benzodiazepine concentrations in the breast milk and plasma of nursing mothers: Estimation of relative infant dose. Breastfeed Med 2021;16:424–31.33449825
5 Shitreh G, Van Neste M, Ceulemans M, et al. Lorazepam during breastfeeding: a pharmacokinetic case report and exploratory pharmacovigilance assessment - a contribution from the ConcePTION project. Front Pharmacol 2026;17:1877310.42422080
6 Kelly LE, Poon S, Madadi P, et al. Neonatal benzodiazepines exposure during breastfeeding. J Pediatr 2012;161:448–51.22504099
7 Sinha SK, Thomas Kishore M, Thippeswamy H, et al. Adverse effects and short-term developmental outcomes of infants exposed to atypical antipsychotics during breastfeeding. Indian J Psychiatry 2021;63:52–7.34083820

## Substance Identification

### Substance Name

Lorazepam

### CAS Registry Number

846-49-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Hypnotics and Sedatives

Anti-Anxiety Agents

Benzodiazepines